# Nonoxynol-9

CASRN: 26571-11-9

## Drug Levels and Effects

### Summary of Use during Lactation

Nonoxynol-9 is a relatively nontoxic nonionic surfactant and only trivial amounts of the drug have been found in the milk of animals after vaginal administration.[1] Limited information indicates that breastfed infants of mothers using vaginal nonoxynol-9 experienced no adverse effects. Vaginal use of nonoxynol-9 is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study comparing various methods of contraception, the breastfed infants of women who used a nonoxynol-9-containing foam had no observable adverse effects.[2]

### Effects on Lactation and Breastmilk

Compared with a combination contraceptive containing ethinyl estradiol 30 mcg and levonorgestrel 150 mcg, women who used either nonoxynol-9 foam or copper-T IUD had less inhibition of lactation than the combined oral contraceptive.[2]

### Alternate Drugs to Consider

Etonogestrel, Intrauterine Copper Contraceptive, Oral Levonorgestrel, Intrauterine Levonorgestrel, Levonorgestrel Implant, Medroxyprogesterone Acetate, Norethindrone, Progesterone

### References

1 Johnson W, Jr. Final report on the safety assessment of octoxynol-1, octoxynol-3, octoxynol-5, octoxynol-6, octoxynol-7, octoxynol-8, octoxynol-9, octoxynol-10, octoxynol-11, octoxynol-12, octoxynol-13, octoxynol-16, octoxynol-20, octoxynol-25, octoxynol-30, octoxynol-33, octoxynol-40, octoxynol-70, octoxynol-9 carboxylic acid, octoxynol-20 carboxylic acid, potassium octoxynol-12 phosphate, sodium octoxynol-2 ethane sulfonate, sodium octoxynol-2 sulfate, sodium octoxynol-6 sulfate, and sodium octoxynol-9 sulfate. Int J Toxicol 2004;23 Suppl 1:59-111.15162838
2 Peralta O, Díaz S, Juez G, et al. Fertility regulation in nursing women: V. Long-term influence of a low-dose combined oral contraceptive initiated at day 90 postpartum on lactation and infant growth. Contraception 1983;27:27-38.6404597

## Substance Identification

### Substance Name

Nonoxynol-9

### CAS Registry Number

26571-11-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents

Spermatocidal Agents